# Ozenoxacin

CASRN: 245765-41-7

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on ozenoxacin cream during breastfeeding. Because ozenoxacin is poorly absorbed after topical application, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants after maternal application away from the breast. Although quinolones are generally acceptable for systemic use, ozenoxacin should be avoided on the nipple because the infant could ingest the drug via licking.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Mupirocin

## Substance Identification

### Substance Name

Ozenoxacin

### CAS Registry Number

245765-41-7

### Drug Class

- Breast Feeding
- Lactation
- Quinolones
- Anti-Infective Agents, Local
- Anti-Bacterial Agents